# Thioridazine

CASRN: 50-52-2

## Drug Levels and Effects

### Summary of Use during Lactation

Because there is no published experience with thioridazine during breastfeeding, an alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Phenothiazines cause galactorrhea in 26 to 40% of female patients.[1,2] Hyperprolactinemia appears to be the cause of the galactorrhea.[3-6] There is some evidence that thioridazine increases serum prolactin to a greater extent than other phenothiazines.[7] The hyperprolactinemia is caused by the drug's dopamine-blocking action in the tuberoinfundibular pathway.[8] The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

### Alternate Drugs to Consider

Haloperidol, Olanzapine, Quetiapine, Risperidone

### References

1 Polishuk WZ, Kulcsar S. (1956). Effects of chlorpromazine on pituitary function. J Clin Endocrinol Metab.
2 Hooper JH, Welch VC, Shackelford RT. (1961). Abnormal lactation associated with tranquilizing drug therapy. JAMA.
3 Turkington RW. (1972). Prolactin secretion in patients treated with various drugs: Phenothiazines, tricyclic antidepressants, reserpine, and methyldopa. Arch Intern Med.
4 Turkington RW. (1972). Serum prolactin levels in patients with gynecomastia. J Clin Endocrinol Metab.
5 Beumont PJ, Gelder MG, Friesen HG, et al. (1974). The effects of phenothiazine on endrocrine function: I Patients with inappropriate lactation and amenorrhoea. Br J Psychiatry.
6 Meltzer HY, Fang VS. (1976). The effect of neuroleptics on serum prolactin in schizophrenic patients. Arch Gen Psychiatry.
7 Goodnick PJ, Rodríguez L, Santana O. (2002). Antipsychotics: Impact on prolactin levels. Expert Opin Pharmacother.
8 Maguire GA. (2002). Prolactin elevation with antipsychotic medications: Mechanisms of action and clinical consequences. J Clin Psychiatry.

## Substance Identification

### Substance Name

Thioridazine

### CAS Registry Number

50-52-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antipsychotic Agents

Phenothiazines